# Abatacept

CASRN: 332348-12-6

## Drug Levels and Effects

### Summary of Use during Lactation

Abatacept is a large fusion protein that interferes with T-cell activation. It has a molecular weight of 92,000, so only small amounts are expected to enter breastmilk and absorbed by the infant.[1] Case reports indicate that amounts in milk are very low and do not appear to affect the breastfed infant. Some professional guidelines consider abatacept to be acceptable during breastfeeding.[1-3] Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[4]

### Drug Levels

Maternal Levels. A woman with rheumatoid arthritis resumed weekly doses of abatacept 125 mg subcutaneously 2 days after delivery. Maternal serum and breastmilk samples were obtained after the 9th and 10th doses. Peak abatacept concentrations in milk occurred at about 3 days after each dose at 256 mcg/L. Prior to the next dose, the trough concentration was 170 mcg/L. The authors estimated the daily infant dose to be between 25 and 38 mcg/kg, which translates into a weight-adjusted percent of maternal dosage of 1 to 1.5% (median 1.3%).[5]

Two lactating women who were receiving abatacept for rheumatoid arthritis donated milk samples for analysis. The first, who was receiving a subcutaneous dose of 125 mg once weekly, had a peak milk level of about 200 mcg/L at 3 days after the dose and a level of about 100 mcg/L at 7 days after the dose. The second, who was receiving an intravenous dose of 500 mg every 2 weeks, had a peak milk level of about 100 mcg/L at 3 days after the dose and a level of about 50 mcg/L at 7 days after the dose.[6]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman with rheumatoid arthritis resumed weekly doses of abatacept 125 mg subcutaneously 2 days after delivery. Her infant was exclusively breastfed up until 12 months of age. Her infant had no adverse effects and developed normally during this time. She also received routine childhood vaccinations at 3 months of age as well as rotavirus and BCG vaccination at 6 months of age. No infections or adverse immune reactions were seen following the vaccinations.[5]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Rheumatoid Arthritis) Adalimumab, Certolizumab Pegol, Etanercept, Infliximab, Tocilizumab

### References

1 Sammaritano LR, Bermas BL, Chakravarty EE, et al. 2020 American College of Rheumatology Guideline for the Management of Reproductive Health in Rheumatic and Musculoskeletal Diseases. Arthritis Rheumatol 2020;72:529–56.32090480
2 Russell MD, Dey M, Flint J, et al. British Society for Rheumatology guideline on prescribing drugs in pregnancy and breastfeeding: Immunomodulatory anti-rheumatic drugs and corticosteroids. Rheumatology (Oxford) 2023;62:e48–e88.36318966
3 Rüegg L, Pluma A, Hamroun S, et al. EULAR recommendations for use of antirheumatic drugs in reproduction, pregnancy, and lactation: 2024 update. Ann Rheum Dis 2025.40287311
4 Krysko KM, Dobson R, Alroughani R, et al. Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350–66.36931808
5 Saito J, Yakuwa N, Takai C, et al. Abatacept concentrations in maternal serum and breast milk during breastfeeding and an infant safety assessment: A case study. Rheumatology (Oxford) 2019;58:1692–4.31323087
6 Saito J, Yakuwa N, Hosokawa Y, et al. Establishment of a measurement system to evaluate breast milk transfer of biological agents using dry filter paper: A multi-institutional study. Br J Clin Pharmacol 2024;90:146–57.37548054

## Substance Identification

### Substance Name

Abatacept

### CAS Registry Number

332348-12-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antirheumatic Agents